# Guanfacine

CASRN: 29110-47-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of guanfacine during breastfeeding and its possible negative effects on lactation, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Published information on the effects of guanfacine on serum prolactin or on lactation in nursing mothers was not found as of the revision date. Guanfacine decreases basal serum prolactin in men and nonnursing women. Serum prolactin continues to decrease for at least 7 years during continuous use.[1] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate (Hypertension) Candesartan, Captopril, Benazepril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Hauger-Klevene JH, Balossi EC, Scornavacchi JC. Effects of guanfacine on growth hormone, prolactin, renin, lipoproteins and glucose in essential hypertension. Am J Cardiol 1986;57:27E-31E.3513527

## Substance Identification

### Substance Name

Guanfacine

### CAS Registry Number

29110-47-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic alpha-2 Receptor Agonists